# Quinidine

CASRN: 56-54-2

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of quinidine up to 1.8 grams daily produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. Exclusively breastfed infants should be carefully monitored if this drug is used during lactation, possibly including measurement of serum levels to rule out toxicity if there is a concern.

### Drug Levels

Maternal Levels. In one case report, a quinidine milk level of 6.4 mg/L was reported 3 hours after a dose while taking 600 mg every 8 hours orally of a sustained-release quinidine sulfate preparation (Quninidex). In the same patient, a random milk level of 8.2 mg/L was also measured.[1] Data from this case indicate that a breastfed infant would receive about 3 to 4% of the maternal weight-adjusted dosage of quinidine.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Hill LM, Malkasian GD, Jr. The use of quinidine sulfate throughout pregnancy. Obstet Gynecol 1979;54:366-8 471380

## Substance Identification

### Substance Name

Quinidine

### CAS Registry Number

56-54-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiarrhythmics